# Mepolizumab

CASRN: 196078-29-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of mepolizumab during breastfeeding. Because mepolizumab is a large protein molecule with a molecular weight of 149,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] A task force respiratory experts from Europe, Australia and New Zealand found that mepolizumab is possibly acceptable during breastfeeding and an international consensus panel concluded that if the patient is in agreement, and the risks and benefits have been discussed, asthma biologics can be initiated or continued while breastfeeding.[3,4] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[5]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Asthma) Benralizumab, Omalizumab

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
3 Middleton PG, Gade EJ, Aguilera C, et al. ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208.31699837
4 Naftel J, Jackson DJ, Coleman M, et al. An international consensus on the use of asthma biologics in pregnancy. Lancet Respir Med 2024.39216499
5 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808

## Substance Identification

### Substance Name

Mepolizumab

### CAS Registry Number

196078-29-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Allergic Agents

Anti-Asthmatic Agents

Antibodies, Monoclonal, Humanized